# Transcutaneous Electric Nerve Stimulation

## Drug Levels and Effects

### Summary of Use during Lactation

Transcutaneous electric nerve stimulation (TENS) is a method of using electrical stimulation of nerves using electrodes affixed to the skin. It is most often used to treat pain. Two small, low-quality studies found it useful for alleviating uterine pain caused by breastfeeding in the early postpartum period in hospitalized women. There are also anecdotal reports of TENS being used for nipple stimulation to induce lactation in adoptive mothers.[1] However, no scientific evaluation of the safety or efficacy of this use could be located.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

A small, single-blinded study in Sweden compared high-intensity to low-intensity TENS for the alleviation of post-partum uterine pain during breastfeeding in the 24 hours following birth. The high-intensity TENS was more effective.[2]

A small nonblinded study in Brazil compared uterine pain in hospitalized women who were experiencing uterine pain during breastfeeding in the immediate postpartum period. One group received TENS and the other did not. None of the patients used any other form of analgesia. Pain experienced at two different occasions during breastfeeding were compared. The decrease in pain from the first to second occasion was greater in the group receiving TENS.[3]

### References

1 Smith KL. How do I use a TENS unit to stimulate lactation? Breast Notescom.http://breastnotes.com/breastfeeding/BrFd-ReLac-TENS.htm
2 Olsén MF, Elden H, Janson ED, et al. A comparison of high- versus low-intensity, high-frequency transcutaneous electric nerve stimulation for painful postpartum uterine contractions. Acta Obstet Gynecol Scand 2007;86:310-4 17364305
3 de Sousa L, Gomes-Sponholz FA, Nakano AM. Transcutaneous electrical nerve stimulation for the relief of post-partum uterine contraction pain during breast-feeding: A randomized clinical trial. J Obstet Gynaecol Res 2014;40:1317-23 24750301

## Substance Identification

### Substance Name

Transcutaneous Electric Nerve Stimulation

### Drug Class

Breast Feeding

Lactation

Milk, Human

Electric Stimulation Therapy

Galactogogues